# Voxelotor

CASRN: 1446321-46-5

## Drug Levels and Effects

### Summary of Use during Lactation

Voxelotor is an orally administered drug that binds to hemoglobin S, inhibiting polymerization. No information is available on the appearance of voxelotor in milk or on the safety of the drug in breastfed infants, but its low molecular weight of 337 Da indicates that it probably passes into milk. Because of the potential for serious adverse reactions in the infant, breastfeeding is currently not recommended during treatment and for at least 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Voxelotor

### CAS Registry Number

1446321-46-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hematologic Agents